# Vortioxetine

CASRN: 508233-74-7

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of vortioxetine in milk appear to be low. If vortioxetine is required by the mother, it is not a reason to discontinue breastfeeding. However, until more data are available, vortioxetine should be used with careful infant monitoring during breastfeeding.

### Drug Levels

Maternal Levels. Three lactating mothers were taking vortioxetine for depression, two were taking 10 mg once daily and one was taking 20 mg once daily. Milk samples were taken 5 times over a 24-hour period before the dose and at 5, 7, 10, 12, and 24 hours after a dose at steady state. With the dose of 10 mg, the peak concentration of vortioxetine in milk was 13.9 mcg/L at 7 hours after the dose. With the dose of 20 mg, the peak milk concentration was 52.3 mcg/L at 5 hours after the dose. The weight-adjusted infant dosages were 1.1% for 10 mg dose and 1.7% for 20 mg dose.[1]

A woman who was taking a vortioxetine dose of 76.1 mcg/kg daily collected 6 to 8 milk samples over a 24-hour period. The peak milk level was 8.2 mcg/L and the mean concentration was 6 mcg/L. Using the mean value, the absolute infant dose in a fully breastfed infant would be 0.9 mcg/kg daily and the relative infant dose would be 1.2% of the mother’s weight-adjusted dosage.[2]

A Japanese woman with depression was taking vortioxetine 20 mg zolpidem 10 mg, duloxetine 20 mg, rebamipide 100 mg and the Asian herbal medicine Kami-kihi-tou 2.5 grams daily. On day 4 postpartum, she collected a sample of 5 mL of foremilk 2 hours after her vortioxetine dose. The milk sample contained 9.3 mcg/L which the authors used to calculate a relative infant dose of 0.32%.[3] This may not represent the maximum value, because the peak milk level occurred at 7 hours after a dose in another study.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Three lactating mothers were taking vortioxetine for depression, two were taking 10 mg once daily and one was taking 20 mg once daily. All mothers were exclusively breastfeeding their infants aged 1, 2 and 6 months of age. No mothers reported any unusual behavior in their infants.[1]

A woman who was taking a vortioxetine dose of 76.1 mcg/kg daily partially breastfed her infant. She did not observe any adverse effects in her infant.[2]

A postpartum Japanese woman with depression was taking vortioxetine 20 mg zolpidem 10 mg, duloxetine 20 mg, rebamipide 100 mg and the Asian herbal medicine Kami-kihi-tou 2.5 grams daily. She partially (over 50%) breastfed her infant for 3 months. The infant had no detectable drug-related adverse effects on routine follow-up at 1, 3, 5, 7 and 9-months postpartum.[3]

### Effects on Lactation and Breastmilk

Vortioxetine has caused hyperprolactinemia and galactorrhea in some patients.[4,5]

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[6] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[7] None of the mothers were taking vortioxetine.

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[8]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Marshall K, Datta P, Rewers-Felkins K, et al. Transfer of the serotonin modulator vortioxetine into human milk: A case series. Breastfeed Med 2021;16:843-5.33861632
2 Monfort A, Jutras M, Martin B, et al. Simultaneous quantification of 19 analytes in breast milk by liquid chromatography-tandem mass spectrometry (LC-MS/MS). J Pharm Biomed Anal 2021;204:114236.34273657
3 Kiribayashi M, Suda T, Takahashi M, et al. Vortioxetine exposure during pregnancy and lactation: A Japanese case study of neonatal implications and quantitative milk and plasma analyses. Breastfeed Med 2024;19:659-62.38726594
4 Verma A, Kumar A. Risks associated with vortioxetine in the established therapeutic indication. Curr Neuropharmacol 2021;19:711-7.32811416
5 Ozkan HM. Galactorrhea and hyperprolactinemia during vortioxetine use: Case report. Turk Biyokim Derg 2019;44:105-7. doi:10.1515/tjb-2018-0106
6 Venkatesh KK, Castro VM, Perlis RH, et al. Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
7 Leggett C, Costi L, Morrison JL, et al. Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
8 Grzeskowiak LE, Saha MR, Nordeng H, et al. Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Vortioxetine

### CAS Registry Number

508233-74-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Serotonin Uptake Inhibitors

Serotonin 5-HT1 Receptor Agonists

Serotonin 5-HT1 Receptor Antagonists

Serotonin 5-HT3 Receptor Antagonists